# Tocainide

CASRN: 41708-72-9

## Drug Levels and Effects

### Summary of Use during Lactation

Tocainide was removed from the market in the United States in 2003 because it can cause serious and potentially fatal hematological adverse effects. Limited data indicate that rather large amounts of tocainide are excreted into breastmilk. Because of the relative lack of data concerning breastfeeding during maternal tocainide therapy and is potential toxicity, tocainide should be avoided during breastfeeding.

### Drug Levels

Maternal Levels. One woman taking tocainide 400 mg every 8 hours orally during the early postpartum period had levels of 12 mg/L at 0.5 hour before a dose and 28 mg/L at 2 hours after a dose.[1] These data indicate that an exclusively breastfed infant would receive between 9 and 21% of the maternal weight-adjusted dosage.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Wilson JH. Breast milk tocainide levels. J Cardiovasc Pharmacol 1988;12:497 2465453

## Substance Identification

### Substance Name

Tocainide

### CAS Registry Number

41708-72-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiarrhythmics